# Methenamine Hippurate

CASRN: 5714-73-8

## Drug Levels and Effects

### Summary of Use during Lactation

Methenamine passes into milk in small quantities and appears safe to use, even while nursing a newborn.

### Drug Levels

Maternal Levels. Six mothers nursing newborn infants were given methenamine hippurate 1 gram orally. Five hours after the dose, a mean methenamine concentration of 7 mg/L was found in milk. In two other women, milk concentrations averaged 9.1 mg/L at 2 to 3 hours after a 1 gram dose of methenamine hippurate orally and 4.3 mg/L at 6 to 7 hours after the dose. Based on the amount of milk ingested, the authors calculated the dose the infants received to be 0.05 to 0.1 mg/kg, which is about 1% of the adult dose.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Four newborn infants were allowed to breastfeed in one study after a maternal dose of 1 gram of methenamine hippurate. No adverse effects were reported.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Methenamine Mandelate

### References

1 Allgén LG, Holmberg G, Persson B, et al. (1979). Biological fate of methenamine in man. Acta Obstet Gynecol Scand.

## Substance Identification

### Substance Name

Methenamine Hippurate

### CAS Registry Number

5714-73-8

### Drug Class

Breast Feeding

Lactation

Anti-Infective Agents, Urinary